# Carbachol

CASRN: 51-83-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of carbachol ophthalmic drops during breastfeeding. Because of its short half-life, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. In animals, cholinergic drugs increase oxytocin release, and have variable effects on serum prolactin.[1,2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Clarke G, Fall CH, Lincoln DW, et al. (1978). Effects of cholinoceptor antagonists on the suckling-induced and experimentally evoked release of oxytocin. Br J Pharmacol.
2 Müller EE, Locatelli V, Cella S, et al. (1983). Prolactin-lowering and -releasing drugs: Mechanisms of action and therapeutic applications. Drugs.

## Substance Identification

### Substance Name

Carbachol

### CAS Registry Number

51-83-2

### Drug Class

Breast Feeding

Lactation

Miotics

Muscarinic Agonists

Parasympathomimetics